# Fruquintinib

CASRN: 1194506-26-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of fruquintinib during breastfeeding. Because fruquintinib is 95% bound to plasma proteins, the amount in milk is likely to be low. However, the manufacturer recommends that breastfeeding be discontinued during fruquintinib therapy and for 2 weeks after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Fruquintinib

### CAS Registry Number

1194506-26-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Enzyme Inhibitors

Protein Kinase Inhibitors

Signal Transduction Inhibitors